# Glucagon

CASRN: 16941-32-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of glucagon during breastfeeding. Because glucagon is a large protein molecule with a molecular weight of 3483 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract. Glucagon has also been safely given directly to infants by injection. No special precautions are required.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Glucagon

### CAS Registry Number

16941-32-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Gastrointestinal Agents

Hormones